# Methotrexate

CASRN: 59-05-2

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal doses of methotrexate up to 92 mg (1.12 mg/kg) produce low levels in milk. Pharmacokinetic modeling predicts infant exposure to be less than 1% of the mothers with weekly doses of 25 mg or less.[1] Recent guidelines state that low single or weekly doses, such as those used for ectopic pregnancy or rheumatoid arthritis (25 mg per week or less), are an acceptable alternative during breastfeeding,[2,3] although some older expert opinion warns against this use.[4,5] Withholding breastfeeding for 24 hours after a weekly low dose of methotrexate may decrease the infant's dose by 40%.[6-8] If breastfeeding during long-term, low-dose methotrexate use is undertaken, monitoring of the infant's complete blood count and differential and liver enzymes can be considered.

Most sources consider breastfeeding to be contraindicated during maternal high-dose antineoplastic drug therapy with methotrexate. An abstinence period of at least 1 week after chemotherapy doses of methotrexate has been suggested.[9] Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[10] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[11]

### Drug Levels

Methotrexate is partially metabolized to the active metabolite, 7-hydroxymethotrexate, which is detectable in breastmilk.

Maternal Levels. One patient who was 1 month postpartum was given 22.5 mg (15 mg/square meter) methotrexate daily by mouth for choriocarcinoma. Milk was collected at various times of the first 12 days of therapy and measured using an old bioassay. A peak milk level of 2.3 mcg/L occurred 10 hours after the first dose. However, the milk level was relatively constant during the period from 4 to 10 hours after the dose, after which it began to drop. Peak milk levels on the second and third days of administration were 2.7 mcg/L. The authors estimated that a cumulative amount of 0.32 mcg would be excreted in milk during the first 12 hours after this dose.[12] Assuming a maternal weight of 60 kg and using the highest milk level, the worst-case relative infant dose would be about 0.1%

A woman was given a single intramuscular dose of 65 mg (50 mg/square meter) of methotrexate for ectopic pregnancy. Six milk samples were obtained from 1 to 24 hours after the dose. Methotrexate was undetectable (<22.7 mcg/L) in all milk samples.[13]

A woman with rheumatoid arthritis received hydroxychloroquine, sulfasalazine and prednisone 10 mg daily during pregnancy and postpartum. On day 151 postpartum, methotrexate 25 mg was given subcutaneously. Breastmilk samples were obtained at 2, 12 and 24 hours after the dose. Milk levels were 0.05 micromolar (22.7 mcg/L) in all samples, which was considered detectable, but not quantifiable. A fully breastfed infant would receive 3.4 mcg/kg in the first 24 hours after administration, or about 1% of the weight-adjusted maternal dosage.[14]

Two lactating women receiving subcutaneous methotrexate 25 mg once weekly donated 4 to 7 milk samples over a 1-week period between doses. Peak breastmilk methotrexate milk concentrations occurred between 1 and 12 hours after the dose and were 4 nmol/L (1.8 mcg/L). Peak breastmilk milk concentrations of the active metabolite, 7-hydroxymethotrexate, occurred at 24 hours after the dose and were 1.8 nmol/L (846 ng/L). Milk methotrexate concentrations were less than 2.5 nmol/L (1.1 mcg/L) during the rest of the dosing interval after the peak. One patient had undetectable (<91 ng/L) milk levels between 5 and 7 days after the dose. The authors estimated that if the peak methotrexate level were sustained throughout the feeding, the relative infant dose would be 0.5% of the weight-adjusted maternal dose and if breastfeeding were withheld for the first 24 hours after the dose, this value would decrease to 0.3% of the weight-adjusted maternal dose.[6]

A woman with placenta accretia received intramuscular methotrexate 92 mg (1.12 mg/kg) daily for 4 days, beginning on day 5 postpartum. On day 2 of therapy, she provided samples of breastmilk at baseline and 1, 2, 4, 8, 12, and 24 hours after the dose. The peak methotrexate milk concentration of 16.9 mcg/L occurred at 2 hours after the dose, which decreased to 4.9 mcg/L at 24 hours. The average methotrexate milk level over the 24-hour period was 8.6 mcg/L. The peak 7-hydroxymethotrexate milk concentration of 3 mcg/L occurred at 1 hour after the dose. The average 7-hydroxymethotrexate milk level over the 24-hour period was 1.5 mcg/L. The estimated daily dosages of methotrexate and 7-hydroxymethotrexate were estimated to be 1.2 mcg/kg and 0.2 mcg/kg, respectively. These represent infant dosages of 0.11% and 0.02% of maternal weight-adjusted dosages.[7]

Milk samples from 7 women receiving methotrexate weekly for inflammatory conditions were used to construct a physiologically based pharmacokinetic (PBPK) model for methotrexate in doses of 10 to 25 mg weekly. An infant PBPK model was used to simulate infant plasma concentrations from methotrexate in breastmilk. Infants breastfed by women during low-dose weekly methotrexate therapy are predicted to have less than 1% of the corresponding maternal exposures.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Weekly methotrexate 25 mg subcutaneously begun a nursing mother on day 151 postpartum. The estimated intake of the infant at that time was 3.4 mcg/kg in the first 24 hours after administration. The mother continued to breastfeed (extent not stated) for an additional 9 months while receiving subcutaneous methotrexate 25 mg weekly. No adverse effects were noted in the infant.[14]

Three postpartum women were erroneously dispensed methotrexate 2.5 mg daily instead of methylergonovine. They took methotrexate daily for 5, 13 and 15 days, respectively, while they were breastfeeding (extent not stated). Although all of the women developed toxicity and required hospitalization, none of their infants had clinically observable complications.[15]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Auranofin, Etanercept, Gold Sodium Thiomalate, Hydroxychloroquine, Infliximab, Penicillamine, Sulfasalazine; (Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin

### References

1 Wang S, Thorne C, Tin D, et al. Reassessing the use of low-dose methotrexate during breastfeeding: Modeling, exposure and risk analysis. Clin Pharmacol Ther 2026;119 (Suppl 1):S15. doi:10.1002/cpt.70201
2 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
3 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1–S60.40874901
4 Laube R, Selinger CP, Seow CH, et al. Australian inflammatory bowel disease consensus statements for preconception, pregnancy and breast feeding. Gut 2023;72:1040–53.36944479
5 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1–27.36005814
6 Delaney S, Colantonio D, Ito S. Methotrexate in breast milk. Birth Defects Res 2017;109:711. doi:10.1002/bdr2.1061
7 Baker T, Datta P, Rewers-Felkins K, et al. High-dose methotrexate treatment in a breastfeeding mother with placenta accreta: A case report. Breastfeed Med 2018;13:450–2.29985651
8 CRAT. Méthotrexate – Grossesse et allaitement. 2020https://www.lecrat.fr/spip.php?page=article&id_article=469
9 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207–11.23199900
10 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
11 Stopenski S, Aslam A, Zhang X, et al. After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91–7.28170295
12 Johns DG, Rutherford LD, Leighton PC, et al. Secretion of methotrexate in human milk. Am J Obstet Gynecol 1972;112:978–80.5042796
13 Tanaka T, Walsh W, Verjee Z, et al. Methotrexate use in a lactating woman with an ectopic pregnancy. Birth Defects Res A Clin Mol Teratol 2009;85:494. doi:10.1002/bdra.20605
14 Thorne JC, Nadarajah T, Moretti M, et al. Methotrexate use in a breastfeeding patient with rheumatoid arthritis. J Rheumatol 2014;41:2332.25362724
15 Celentano AA, Ferruzzi MM, Sesana FF, et al. Same initial drug name and pharmacist dispensing errors: A case series. Clin Toxicol 2023;61 (Suppl 1):102–3. doi:10.1080/15563650.2023.2192024

## Substance Identification

### Substance Name

Methotrexate

### CAS Registry Number

59-05-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Abortifacient Agents, Nonsteroidal

Antimetabolites, Antineoplastic

Antirheumatic Agents

Folic Acid Antagonists

Immunosuppressive Agents